# Budesonide

CASRN: 51333-22-3

## Drug Levels and Effects

### Summary of Use during Lactation

The amounts of inhaled budesonide excreted into breastmilk are minute and infant exposure is negligible. When taken by mouth, budesonide is only about 9% bioavailable; bioavailability in the infant is likely to be similarly low for any budesonide that enters the breastmilk. Expert opinion considers inhaled, nasal, oral and rectal corticosteroids acceptable to use during breastfeeding.[1-3]

### Drug Levels

Maternal Levels. The manufacturer reports that the maximum budesonide plasma concentration following a 9 mg daily dose in both single- and repeated-dose pharmacokinetic studies of oral budesonide ranges from 2.15 to 4.31 mcg/L, which is 10 times higher than with inhaled budesonide. With rectal budesonide, maternal serum levels are about 0.4 mcg/L. Inhaled budesonide results in a relative infant dose of 0.3%, so the oral dose could provide an oral weight-adjusted dose of 3% to a breastfed infant. However, since the drug is only about 9% absorbed orally, the infant’s systemic RID after maternal oral use would be about 0.27%. The RID after rectal budesonide would be about 0.025%.

Eight women with asthma were using inhaled budesonide 200 mcg (n = 4) or 400 mcg twice daily (n = 4) by Pulmicort Turbihaler. Peak milk levels of budesonide of 168 ng/L and 335 ng/L occurred at 32 and 43 minutes after inhalation with the 200 mcg and 400 mcg doses, respectively. Average infant doses were estimated to be 6.8 and 14.2 ng/kg daily for the 200 mcg and 400 mcg dosages. A fully breastfed infant would receive a maximum of 0.3% of the weight-adjusted maternal dosage, assuming 100% oral bioavailability from breastmilk.[4]

Infant Levels. Four infants whose mothers were taking budesonide 200 mcg (n = 2) or 400 mcg (n = 2) twice daily by Pulmicort Turbihaler. The infants had serum samples taken 1.5 hours (range 0.7 to 2 hours) after the first breastfeeding after drug administration and 2.3 hours (range 2.1 to 2.6 hours) after maternal drug inhalation. All had undetectable (<8.6 to 17.2 ng/L) serum budesonide concentrations.[4]

### Effects in Breastfed Infants

None reported with any corticosteroid.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Inhalation) Beclomethasone

### References

1 National Heart, Lung, and Blood, Institute, National Asthma, Education, and, Prevention, Program, Asthma, and, Pregnancy, Working, Group. NAEPP expert panel report. Managing asthma during pregnancy: recommendations for pharmacologic treatment-2004 update. J Allergy Clin Immunol 2005;115:34-46.15637545
2 Middleton PG, Gade EJ, Aguilera C, et al. ERS/TSANZ Task Force Statement on the management of reproduction and pregnancy in women with airways diseases. Eur Respir J 2020;55:1901208.31699837
3 McConnell RA, Mahadevan U. Pregnancy and the patient with inflammatory bowel disease: Fertility, treatment, delivery, and complications. Gastroenterol Clin North Am 2016;45:285-301.27261899
4 Fält A, Bengtsson T, Kennedy BM, et al. Exposure of infants to budesonide through breast milk of asthmatic mothers. J Allergy Clin Immunol 2007;120:798-802.17825891

## Substance Identification

### Substance Name

Budesonide

### CAS Registry Number

51333-22-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Asthmatic Agents

Corticosteroids, Inhaled

Anti-allergic Agents

Corticosteroids, Systemic

Glucocorticoids

Anti-Inflammatory Agents